# Pyrazinamide

CASRN: 98-96-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal pyrazinamide therapy produces potentially substantial levels in milk. Exclusively breastfed infants should be monitored for rare cases of jaundice, hepatitis and arthralgia if this drug is used during lactation.[1] The amount of pyrazinamide in milk is probably insufficient to treat tuberculosis in the breastfed infant, but if both the mother and breastfed infant are receiving the drug, infant serum levels could be monitored to assess for excessive infant serum concentrations. The Centers for Disease Control and Prevention and other professional organizations state that breastfeeding should not be discouraged in women taking pyrazinamide.[2]

### Drug Levels

Maternal Levels. One woman who was lactating, but not breastfeeding (time postpartum not stated) was given a single oral dose of 1 gram of pyrazinamide. A peak milk level of 1.5 mg/L occurred 3 hours after the dose. The half-life of the drug in milk was estimated to be 9 hours.[1] Using these data, a fully breastfed infant would receive a maximum of about 1.4% of the maternal weight-adjusted dosage.

Two breastfeeding women with tuberculosis were receiving pyrazinamide as well as at least 4 other antituberculars donated 1 mL breastmilk samples by manual expression at approximately 6 weeks postpartum. Samples were obtained immediately prior to a dose and 2, 4, and 6 hours after a dose of 1750 mg of pyrazinamide. Peak milk pyrazinamide concentrations of 38.4 and 59.2 mg/L occurred at about 4 hours after a dose. The authors used the peak concentrations to calculate infant daily dosages of 5.76 and 8.88 mg/kg, which ranged from 14 to 30% of the infant dosage and 17 to 28% of the maternal weight-adjusted dosage. These values may be overestimates because peak milk concentrations were used rather than average concentrations.[3] Another group of authors used data from this study and other pharmacokinetic studies to estimate infant dosages of 7.1 and 10.9 mg/kg daily in these patients which represent 47% and 73% of the infant dosage. However, the authors used a nonstandard milk volume in their calculation. Using the standard 150 mL/kg daily, the estimated infant dosages would be 5.8 and 8.8 mg/kg daily in these patients, which represent 38% and 59% of the infant dosage.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Pyrazinamide was used as part of multi-drug regimens to treat 2 pregnant women with multidrug-resistant tuberculosis throughout pregnancy and postpartum. Their two infants were breastfed (extent and duration not stated). At age 1.25 and 5.1 years, the children were developing normally.[5]

Two mothers in Türkiye were diagnosed with tuberculosis at the 30th and 34th weeks of pregnancy. They immediately started isoniazid 300 mg, rifampin 600 mg, pyridoxine 50 mg daily for 6 months, plus pyrazinamide 25 mg/kg and ethambutol 25 mg/kg daily for 2 months. Both mothers breastfed their infants (extent not stated). Their infants were given isoniazid 5 mg/kg daily for 3 months prophylactically. Tuberculin skin tests were negative after 3 months and neither infant had tuberculosis at 1 year of age. No adverse effects of the drugs were mentioned.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Holdiness MR. Antituberculosis drugs and breast-feeding. Arch Intern Med 1984;144:1888.6548112
2 Nahid P, Dorman SE, Alipanah N, et al. Official American Thoracic Society/Centers for Disease Control and Prevention/Infectious Diseases Society of America Clinical Practice Guidelines: Treatment of Drug-Susceptible Tuberculosis. Clin Infect Dis 2016;63:e147-e95.27516382
3 Zuma P, Joubert A, van der Merwe M, et al. Validation and application of a quantitative LC-MS/MS assay for the analysis of first-line anti-tuberculosis drugs, rifabutin and their metabolites in human breast milk. J Chromatogr B Analyt Technol Biomed Life Sci 2022;1211:123489.36215877
4 Algharably EA, Kreutz R, Gundert-Remy U. Infant exposure to antituberculosis drugs via breast milk and assessment of potential adverse effects in breastfed infants: Critical review of data. Pharmaceutics 2023;15:1228.37111713
5 Drobac PC, del Castillo H, Sweetland A, et al. Treatment of multidrug-resistant tuberculosis during pregnancy: Long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis 2005;40:1689-92.15889370
6 Keskin N, Yilmaz S. Pregnancy and tuberculosis: To assess tuberculosis cases in pregnancy in a developing region retrospectively and two case reports. Arch Gynecol Obstet 2008;278:451-5.18273625

## Substance Identification

### Substance Name

Pyrazinamide

### CAS Registry Number

98-96-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents